# Cefotaxime

CASRN: 63527-52-6

## Drug Levels and Effects

### Summary of Use during Lactation

Cefotaxime is no longer marketed in the United States. Limited information indicates that cefotaxime produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefotaxime is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Five postpartum women were given 2 grams of cefotaxime twice daily for 4 days. The average peak milk level on day 4 was 0.68 mg/L (range 0.29 to1.57 mg/L). By 12 hours after the dose the drug was undetectable in milk of all 5 women.[1]

After a single 1 gram dose of cefotaxime to 12 women, average peak levels of 0.32 mg/L occurred 2 hours after the dose. The highest milk level recorded was 0.52 mg/L in one woman at 3 hours after the dose.[2,3]

After a single 1 gram dose of cefotaxime to 5 women, the drug was not measurable (<0.1 mg/L) in the mothers' milk at any time up to 6 hours after the dose.[4]

After a single 1 gram intravenous dose in 2 women, cefotaxime milk levels were not measurable at any time up to 6 hours after the dose.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Harms K, Gerke G, Zaloudek D. Konzentrationsbestimmungen von cefotaxim aus der muttermilch. Infection 1980;8 (Suppl 4):S451-3.
2 Kafetzis DA, Lazarides CV, Siafas CA, et al. Transfer of cefotaxime in human milk and from mother to foetus. J Antimicrob Chemother 1980;6 (Suppl A):135-41.6252147
3 Kafetzis DA, Siafas CA, Georgakopoulos PA, Papadatos CJ. Passage of cephalosporins and amoxicillin into the breast milk. Acta Paediatr Scand 1981;70:285-8.7246123
4 Takase Z, Fujiwara M, Kohmoto Y, et al. Study of cefotaxime in the perinatal period. Jpn J Antibiot 1982;35:1893-7.6294369
5 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Cefotaxime

### CAS Registry Number

63527-52-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins